# Cabergoline

CASRN: 81409-90-7

SID: 135013805

## Drug Levels and Effects

### Summary of Use during Lactation

Cabergoline is usually not used during breastfeeding because it suppresses lactation. The U.S. Food and Drug Administration considers cabergoline to be not indicated to suppress lactation because the similar drug bromocriptine has caused hypertension, stroke, seizures and psychosis when used for this purpose. However, two systematic reviews found that cabergoline was generally well tolerated for use in suppressing lactation, but dizziness, headache, nausea and vomiting occur occasionally.[1-3] A retrospective study of 225 women who received cabergoline postpartum had a maximum decrease in systolic blood pressure of 10.88 mm Hg at 20 to 24 hours after the dose.[4] Serious reactions are uncommon, but include thromboembolic and neurologic events. Psychiatric symptoms have occurred rarely, but women requesting lactation suppression with cabergoline are more likely to have anxiety and depression.[5] Some experts recommend cabergoline as a safer alternative to bromocriptine for lactation suppression, but others do not.[6-10] The disadvantage of cabergoline is that it has a half-life of about 68 hours, which means that any adverse effects might persist for a prolonged period of time. Women treated with cabergoline for pituitary adenomas who become pregnant can breastfed their infants with no apparent risk of recurrence. A treatment scheme has been reported for mothers with hypergalactia that uses low doses of cabergoline to decrease milk supply.[11] Decreased milk synthesis may occur by 2 days after drug administration.[12]

### Drug Levels

Maternal Levels. A mother with a prolactinoma was partially breastfeeding her 2-year-old 2 to 3 times daily while on long-term cabergoline. She received two weekly doses of 0.125 mg during the first period, followed by two weekly doses of 0.250 mg during the second period. On both sampling days (one per dose period), steady-state maternal plasma and milk samples were obtained at two time points. Milk concentrations were below the LOQ (5 ng/L) and the RID was <0.002%.[13]

Infant Levels. A mother with a prolactinoma was partially breastfeeding her 2-year-old 2 to 3 times daily while on a long-term cabergoline regimen. While she was receiving two weekly doses of 0.125 mg, a plasma sample was collected from the breastfed infant and the concentration was below the LOQ (5 mg/L).[13]

### Effects in Breastfed Infants

A woman with acromegaly was treated with lanreotide Autogel 120 mg monthly, cabergoline 2 mg weekly and pegvisomant 80 mg weekly. She breastfed (extent not stated) her infant and they were followed for 12 years. Her child had normal growth and development.[14]

### Effects on Lactation and Breastmilk

Seventeen women who did not wish to breastfeed received a placebo or a single oral dose of cabergoline 400 mcg or 600 mcg on day 2 or 3 postpartum. Use of other lactation suppressing measures (e.g., breast binding, lack of nipple stimulation) was not mentioned. Blood samples were taken periodically over the next 96 hours. In the 7 women who received 400 mcg, plasma prolactin levels were decreased at 24 and 48 hours, but 4 developed breast engorgement. In the 5 women who received 600 mcg, plasma prolactin levels were decreased by 12 hours and persisted up to 96 hours and none developed breast engorgement. Some women had minor decreases in blood pressure, but no other adverse effects were reported.[15]

Thirty-two women who did not wish to breastfeed were given placebo or cabergoline 400, 600 or 800 mcg within 24 hours after delivery in a double-blind trial. Use of other lactation suppressing measures (e.g., breast binding, lack of nipple stimulation) was not mentioned. Lactation was prevented in 4 of 8 women who received the 400 mcg dose and all women who received the 600 or 800 mcg dose. Only 1 of 8 women receiving placebo had cessation of lactation by day 14 postpartum. Serum prolactin levels collected on days 2, 3 and 4 of treatment were decreased significantly in all women who received cabergoline, but the decreases were not statistically different among the various doses.[16]

A prospective, randomized, double-blinded study compared the effects of a single dose of cabergoline 0.5, 0.75 or 1 mg in 40 women each and to 20 women who received a placebo. The drug was given in the first 24 hours postpartum and use of other lactation suppressing measures (e.g., breast binding, lack of nipple stimulation) was not mentioned. The adequacy of lactation suppression on day 14 postpartum was dose-related, with excellent results in 18 patients who receive 0.5 mg, 28 who received 0.75 mg and 36 who received 1 mg. Serum prolactin levels collected during 13 days of treatment were decreased significantly in all women who received cabergoline, but the decreases were not statistically different among the various doses. Adverse effects included occasional dizziness and headache between days 1 and 3 after the dose.[17]

In a single-blind trial, 36 women were given either a single oral dose of cabergoline 1 mg or oral bromocriptine 2.5 mg twice daily for 14 days, starting about 50 hours after cesarean section. Use of other lactation suppressing measures (e.g., breast binding, lack of nipple stimulation) was not mentioned. Another 13 women who were breastfeeding after cesarean section served as controls. Both cabergoline and bromocriptine suppressed baseline serum prolactin by about 90% compared to baseline and control women within 3 days; this persisted at least through day 7, but somewhat rebounded by day 14. Suppression of lactation as measured by milk secretion, tenderness, and engorgement was equal between the 2 treatment groups. Lactation suppression was complete in 17 of 18 women who received cabergoline and 16 of 18 women who received bromocriptine, although the response was more rapid with cabergoline. Adverse events from cabergoline were fewer in number than with bromocriptine and consisted of occasional headache lasting 2 days, dizziness, and vomiting.[18]

A well-designed and evaluated double-blind study compared oral cabergoline 1 mg in a single dose (n = 136) to oral bromocriptine 2.5 mg twice daily for 14 days (n = 136) in women within 27 hours postpartum. Some women in each group (cabergoline n = 18; bromocriptine n = 16) received an ergot alkaloid or oral contraceptive postpartum. Symptoms of milk production and engorgement were recorded by the women and serum prolactin levels were measured on 3 occasions during the first 2 to 3 weeks postpartum. Cabergoline was at least as effective as bromocriptine, with complete success in 78% of cabergoline patients and 69% of bromocriptine patients. The rate of rebound lactation was much higher in bromocriptine patients (24%) than in cabergoline patients (5%). Serum prolactin was suppressed in both groups, but rebound was more common with bromocriptine on days 15 and 21. Adverse effects were numerically, but not statistically less frequent in cabergoline patients, with the most frequent being dizziness, headache, nausea and epigastric pain.[19]

Cabergoline was evaluated for lactation suppression in a prospective, but nonrandomized, unblinded trial. Women who were within 24 hours postpartum were given a single 1 mg dose (n = 54); those who were beyond 24 hours were given 0.25 mg twice daily for 2 days (n = 46). Only composite results were given for the entire group of 100 women. Mean serum prolactin dropped from 181.4 mcg/L (range 153 to 213 mcg/L) on the first day to 12.5 mcg/L (range 0.9 to 37 mcg/L) on day 4, and 18.2 mcg/L (range 2 to 36.2 mcg/L) on day 14 after the dose. Lactation was completely inhibited in 92% of women; 8 women required a second doses of 1 mg to inhibit lactation. Twenty-six percent of women had side effects such as dizziness, headache, nausea and abdominal pain. In 4% of women, side effects were severe enough to require symptomatic treatment.[15,20]

In a prospective, nonrandomized, unblinded trial, 43 women who underwent a second trimester abortion were given cabergoline 1 mg orally to suppress lactation. A single dose was effective in 88% of women.[21]

A randomized, nonblinded trial compared cabergoline 0.5 mg (n = 80) and 1 mg (n = 80) orally in a single dose given at an unstated time in the early postpartum period. The 1 mg dose was more effective in suppressing lactation than the 0.5 mg dose. Headache and nausea were the most common adverse effects.[22]

A woman with acromegaly breastfed her infant for 3 months while taking cabergoline 0.5 mg weekly and lanreotide 30 mg every 28 days.[23]

A follow-up survey was conducted on 91 women who became pregnant after treatment with cabergoline for hyperprolactinemia from pituitary adenomas. Eighty-eight patients breastfed their infants, 35 for less than 2 months and 56 for 2 to 6 months. No patients were restarted on cabergoline after pregnancy. At 3 and 12 months after pregnancy, serum prolactin was slightly higher than prepregnancy levels, but by 60 months postpartum, prolactin levels were lower than prepregnancy levels. Mothers who nursed for more than 2 months had lower serum prolactin at 60 months after cessation of breastfeeding than those who breastfed for less than 2 months. The authors concluded that breastfeeding does not increase the risk of recurrence of hyperprolactinemia.[24]

A woman with severe breast engorgement with nipple cracking and bleeding was started on ibuprofen and cabergoline 0.125 mg daily for 2 days in addition to cold dressing applications. By day 6 postpartum, her breasts softened, the nipple crack receded and the pain decreased. She was able to begin breastfeeding her infant on day 6 and was mostly breastfeeding her infant by day 13 postpartum.[25]

Sixty-seven women with HIV infections were given a single dose of 1 mg of cabergoline within 48 hours postpartum to prevent lactation. Complete or partial suppression of lactation occurred in 98% of women on day 14 and 67% had serum prolactin levels below 25 mcg/L, which is the threshold necessary for galactopoiesis. Ninety-six percent of women were satisfied with cabergoline’s effect on lactation.[26]

A pregnant woman was found to have a nonfunctioning pituitary adenoma. She had a somewhat elevated serum prolactin of 467 mcg/L. Cabergoline 0.25 mg twice weekly was started in the second trimester of pregnancy and continued for 2 weeks postpartum. At 3.5 weeks postpartum her serum prolactin was 16 mcg/L and she produced only drops of milk for the first 8 weeks postpartum. Using an electric breast pump, her milk supply increased to over 800 mL daily by 21 weeks postpartum. At 30.5 weeks postpartum, her serum prolactin was 27 mcg/L.[27]

A woman with acromegaly was treated with lanreotide Autogel 120 mg monthly, cabergoline 2 mg weekly and pegvisomant 80 mg weekly. She was able to breastfeed (extent not stated) her infant.[14]

A woman nursing a 3-month-old infant was diagnosed with ductal carcinoma of the left breast. She was given cabergoline (presumably 1 mg) to stop lactation prior to an 18F-FDG PET/CT scan to delineate the extent of the lesion. The scan performed 2 days after the dose of cabergoline showed no lactation-related radionuclide uptake.[12]

A double-blind, randomized, placebo-controlled study of a single dose of cabergoline 1 mg orally was conducted in women who underwent uterine evacuation for a second-trimester abortion or fetal death. The dose was given within 4 hours of the procedure or fetal expulsion. On post-procedure days 1 to 14, breast symptoms (engorgement, breast tenderness, leaking milk and requiring pharmacologic pain relief) were less in those who received cabergoline than those who received placebo. In a subset of participants, serum prolactin level on day 4 was 6.5 ng/mL for those who received cabergoline compared with 18 ng/ mL receiving placebo; the difference was statistically significant. Hot flushes were significantly less frequent in the cabergoline group on day 4.[3]

A randomized, prospective, but nonmasked study compared cabergoline 1 mg (in one dose or 0.25 mg twice daily for 2 days; n = 45) to pyridoxine 200 mg 3 times daily for 7 days (n = 43) in suppressing lactation in postpartum women who did not wish to breastfeed. Treatment was initiated approximately 24 hours after delivery. Based on patient self-assessment, cabergoline was more effective than pyridoxine for suppressing lactation (78% vs 35%) and in reducing engorgement and pain (89% vs 67%) at day 7. The frequency of milk leakage was lower with cabergoline group after 7 and 14 days compared to pyridoxine (9% vs 42% and 11% vs 31%, , respectively). Headache and constipation were the most commonly reported adverse effects, occurring more frequently in cabergoline patients (15% vs 2%).[28]

In a small preliminary study, women wishing to stop lactation at 1 month postpartum were given cabergoline 500 mg daily for 7 days. The degree of mammary duct dilation was compared before and after treatment in these women and in women who slowly decreased breastfeeding to stop lactation. More mothers who received cabergoline had a reduction in mammary duct dilation on ultrasound than women who did not.[29]

A woman developed hyperprolactinemia and galactorrhea with milk draining from closed-suction surgical drains postoperatively following reduction mammaplasty. Her serum prolactin was 96 ng/mL. On postoperative day 8, cabergoline 0.5 mg twice weekly was started. On postoperative day 32, cabergoline was stopped because serum prolactin had normalized (< 2 ng/mL). Drains were removed and at the postoperative day 45 visit, drainage had ceased.[30]

A 19-year-old 3-week postpartum primigravida patient presented to primary care with a 7-day history of abdominal pain and fatigue. Pregnancy had been asymptomatic and delivery uncomplicated. The finding of hypercalcemia at adjusted calcium levels ranging from 2.79 to 2.90 mmol/L coincidental with parathyroid hormone level of 1.3 pmol/L led to secondary care referral. A history of painful engorged breasts secondary to suckling had led her to milk expression with no symptomatic relief. She had very engorged breasts with typical lactational changes. The finding of low parathyroid hormone level excluded primary hyperparathyroidism and other diagnoses for hypercalcemia were also excluded. She switched to breast milk substitute, but ongoing severe breast discomfort and lactation led to treatment with a single dose of 0.5 mg of cabergoline, which resulted in rapid resolution of symptoms and biochemical abnormalities.[31]

### Alternate Drugs to Consider

(Hyperprolactinemia) Bromocriptine

### References

1 Harris K, Murphy KE, Horn D, et al. Safety of cabergoline for postpartum lactation inhibition or suppression: A systematic review. J Obstet Gynaecol Can 2020;42:308–15.e20. 31285168
2 Yang Y, Boucoiran I, Tulloch KJ, et al. Is cabergoline safe and effective for postpartum lactation inhibition? A systematic review. Int J Womens Health 2020;12:159–70. 32210637
3 Henkel A, Johnson SA, Reeves MF, et al. Cabergoline for lactation inhibition after second-trimester abortion or pregnancy loss: A randomized controlled trial. Obstet Gynecol 2023;141:1115–23. 37486652
4 Humphrey S, Baechler M, Schiff M, et al. Cabergoline for postpartum lactation suppression: Effect on blood pressure and pulse. Int J Gynaecol Obstet 2022;159:776–82. 35304744
5 Zanardo V, Straface G, Borghini C, et al. Pharmacological lactation inhibition upon maternal request: A risk factor for depressive disorder. Minerva Psychiatry 2025;66:70–6. doi:10.23736/s2724-6612.24.02553-3
6 Anon. Inhibiting the onset of lactation: Is cabergoline an alternative to bromocriptine? Prescrire Int 2015;24:276–7. 26688910
7 Marcellin L, Chantry AA. Breast-feeding (part II): Lactation inhibition--Guidelines for clinical practice. J Gynecol Obstet Biol Reprod (Paris) 2015;44:1080–3. 26527027
8 Snellen M, Power J, Blankley G, et al. Pharmacological lactation suppression with D2 receptor agonists and risk of postpartum psychosis: A systematic review. Aust N Z J Obstet Gynaecol 2016;56:336–40. 27297803
9 Tulloch KJ, Dodin P, Tremblay-Racine F, et al. Cabergoline: A review of its use in the inhibition of lactation for women living with HIV. J Int AIDS Soc 2019;22:e25322. 31183987
10 Fachi MM, de Deus Bueno L, de Oliveira DC, et al. Efficacy and safety in the treatment of hyperprolactinemia: A systematic review and network meta-analysis. J Clin Pharm Ther 2021;46:1549–56. 34137053
11 Johnson HM, Eglash A, Mitchell KB, et al. ABM Clinical Protocol #32: Management of hyperlactation. Breastfeed Med 2020;15:129–34. 32031417
12 Kuroda H, Yoshizako T, Yamamoto N, et al. A case of breast cancer: Suppression of lactation-related FDG uptake 2 days after cabergoline administration. Acta Radiol Open 2023;12:20584601231174611. 37163201
13 Lauwerys N, Tommelein E, Van Eeckhaut A, et al. Very low cabergoline exposure via human milk: A literature search and case report. Neurotoxicol Teratol 2026;116:10–1. doi:10.1016/j.ntt.2026.107616
14 Popescu AD, Carsote M, Valea A, et al. Approach of acromegaly during pregnancy. Diagnostics (Basel) 2022;12:2669. 36359512
15 Melis GB, Gambacciani M, Paoletti AM, et al. Dose-related prolactin inhibitory effect of the new long-acting dopamine receptor agonist cabergoline in normal cycling, puerperal, and hyperprolactinemic women. J Clin Endocrinol Metab 1987;65:541–5. 3624413
16 Melis GB, Mais V, Paoletti AM, et al. Prevention of puerperal lactation by a single oral administration of the new prolactin-inhibiting drug, cabergoline. Obstet Gynecol 1988;71:311–4. 3279351
17 Caballero-Gordo A, López-Nazareno N, Calderay M, et al. Oral cabergoline. Single-dose inhibition of puerperal lactation. J Reprod Med 1991;36:717–21. 1683403
18 Giorda G, de Vincentiis S, Motta T, et al. Cabergoline versus bromocriptine in suppression of lactation after cesarean delivery. Gynecol Obstet Invest 1991;31:93–6. 2037265
19 European Multicentre Study Group for Cabergoline in Lactation Inhibition. Single dose cabergoline versus bromocriptine in inhibition of puerperal lactation: Randomised, double blind, multicentre study. BMJ 1991;302:1367–71. 1676318
20 Bracco PL, Armentano G, Pellegrini A, et al. Cabergoline in the inhibition of lactogenesis and suppression of lactopoiesis. Minerva Ginecol 1997;49:469–73. 9463181
21 Pavlista D, Calda P, Zivny J. Arrest of lactation after 2nd trimester abortion with a single dose of cabergoline in comparison with 10-day administration of teguride. Ceska Gynekol 2003;68:46–50. 12708116
22 Bravo-Topete EG, Mendoza-Hernandez F, Cejudo-Alvarez J, et al. Cabergoline for inhibition of lactation. Cir Cir 2004;72:5–9. 15087045
23 Cheng S, Grasso L, Martinez-Orozco JA, et al. Pregnancy in acromegaly: Experience from two referral centers and systematic review of the literature. Clin Endocrinol (Oxf) 2012;76:264–71. 21777265
24 Auriemma RS, Perone Y, Di Sarno A, et al. Results of a single-center observational 10-year survey study on recurrence of hyperprolactinemia after pregnancy and lactation. J Clin Endocrinol Metab 2013;98:372–9. 23162092
25 Coban A, Bayraktar S, Yıldız N, et al. A case study of early postpartum excessive breast engorgement: Is it related to feedback inhibition of lactation? J Hum Lact 2021;37:414–8. 33030995
26 Boucoiran I, Roy M, Poliquin V, et al. Evaluation of cabergoline for lactation inhibition in women living with HIV. Int J STD AIDS 2021;32:654–61. 33612017
27 Bartell GS. Lactogenesis II onset following prolonged delay in a mother with a nonfunctioning macroadenoma treated with cabergoline: A case study in persistence. Clin Lact (Amarillo) 2021;12:22–9. doi:10.1891/clinlact-d-20-00014
28 Dayan-Schwartz A, Yefet E, Manal Massalha, et al. The efficiency of cabergoline versus pyridoxine for lactation inhibition - a randomized controlled trial. Am J Obstet Gynecol 2024;230:561.e1–.e8.
29 Dorovinis G, Zervoudis S, Iatrakis G, et al. Ultrasound detection of mammary duct dilatation after breastfeeding cessation. Rev Clin Pharmacol Pharmacokinet Int Ed 2023;37:5–9. doi:10.5281/zenodo.10051846
30 Hoffpauir LA, Cervantes Valadez S, Brown RH. Successful management of postoperative galactorrhea after reduction mammaplasty. Plast Reconstr Surg Glob Open 2026;14:e8034. 42620427
31 Tellier G, Berkeley R, Hwang MJ, et al. Pseudohyperparathyroidism of lactation successfully treated with carbergoline. Eur J Endocrinol 2026;195 (Suppl 1):i150. doi:10.1093/ejendo/lvag096.304

## Substance Identification

### Substance Name

Cabergoline

### CAS Registry Number

81409-90-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiparkinson Agents

Dopamine Agonists